# Daclatasvir

CASRN: 1009119-64-5

## Drug Levels and Effects

### Summary of Use during Lactation

Daclatasvir is no longer marketed in the United States. It has not been studied in nursing mothers being treated for hepatitis C infection. Because it is 99% bound to maternal plasma proteins, amounts in breastmilk are likely to be very low. If daclatasvir used alone or in combination with sofosbuvir is required by the mother, it is not a reason to discontinue breastfeeding.[1]

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[2–5] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[2,5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Spera AM, Eldin TK, Tosone G, . Antiviral therapy for hepatitis C: Has anything changed for pregnant/lactating women? World J Hepatol 2016;8:557–65.27134703
2 Cottrell EB, Chou R, Wasson N, . Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
3 Pfaender S, Heyden J, Friesland M, . Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
4 Tovo PA, Calitri C, Scolfaro C, . Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
5 Workowski KA, Bachmann LH, Chan PA, . Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.

## Substance Identification

### Substance Name

Daclatasvir

### CAS Registry Number

1009119-64-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

NS5A Inhibitors